# Iodine I-125

CASRN: 14158-31-7

## Drug Levels and Effects

### Summary of Use during Lactation

Iodine I-125 is usually implanted temporarily in a sealed container (plaque or seed) to treat localized tumors. Modeling has shown that when a I-125 seed is implanted within 14 days prior to surgery for breast cancer, contact is considered safe on the contralateral side (i.e., the opposite breast). When the patient prefers to breastfeed or have close contact on the ipsilateral side (the side of the breast cancer), a daily limit of 5 hours ensures that the infant’s cumulative radiation exposure remains below the 1 mSv threshold.[1] The mother’s milk is not affected, and it can be pumped and fed to the infant at a later time.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A mother nursing an 11-month-old infant was treated with an iodine I-125 plaque for uveal melanoma. The plaque was in place for 2 days during which time she was separated from her infant, but pumped milk for later use. Breastfeeding was resumed after plaque removal.[2]

### References

1 Heeling E, van de Kamer JB, Bruining A, et al. The safe use of (125)I-seeds as a surgical localization technique for breast cancer patients during breastfeeding and close contact with an infant. Clin Breast Cancer 2025;25:634–42.e4.40506302
2 Rieth E, Barnett K, Simon J. Perioperative management of a lactating cancer patient undergoing surgical placement and removal of an iodine-125 brachytherapy plaque for uveal melanoma. Breastfeed Med 2020;15:A3–A4. doi:10.1089/bfm.2020.29162.abstracts

## Substance Identification

### Substance Name

Iodine I-125

### CAS Registry Number

14158-31-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Brachytherapy

Iodine Radioisotopes

Radiopharmaceuticals